# Apixaban

CASRN: 503612-47-3

## Drug Levels and Effects

### Summary of Use during Lactation

Information from four mothers indicates that apixaban levels in milk are high, potentially resulting in infant anticoagulation and bleeding, which was confirmed with a pharmacokinetic model. An alternate drug is preferred, especially while nursing a newborn or preterm infant.[1-4]

### Drug Levels

Maternal Levels. A nursing mother who was 23 months postpartum received 2 doses of 5 mg of oral apixaban 12 hours apart. Blood and milk samples were obtained before the first dose and at 3.5, 7, 12 (before the second dose), 16, and 24 hours after the first dose. Peak apixaban milk levels of about 230 mcg/L occurred at 3.5 to 4 hours after each dose. The average milk level over 24 hours was 113.6 mcg/L, which corresponds to a daily infant dosage of 17 mcg/kg daily and a relative infant dose of 12.8% of the maternal weight-adjusted dosage.[3]

Three lactating women were taking 5 mg of apixaban twice daily by mouth and were at steady-state. They extracted milk and provided samples at 0, 1, 2, 4, 6, 8, 10, and 12 hours after a dose. Peak milk levels of apixaban occurred at 1 hours after the dose in one woman and 2 hours after the dose in the others two. Peak levels ranged from 0.2 to 0.25 mg/L and average milk levels ranged from 0.134 to 0.16 mg/L. The absolute infant dosage was calculated to be 10 mcg/kg every 12 hours, which amounted to weight adjusted infant RID values of 14%, 20% and 21% in the three infants.[2]

A physiologically based pharmacokinetic (PBPK) model was constructed to simulate breastmilk and infant serum apixaban concentrations and compared to published data. The model predicted peak milk levels of 212 and 416 mcg/L for dosages of 2.5 and 5 mg twice daily, respectively. Results indicate that the worst-case relative infant dosage in infants would be about 140%.[4]

Another PBPK model that used experimentally derived values for protein binding and transmembrane passage was developed. Simulated RID values were about 11.9% using the average milk concentration and 25.9% using the peak concentrations as a worst-case value.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dabigatran, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Daei M, Khalili H, Heidari Z. Direct oral anticoagulant safety during breastfeeding: A narrative review. Eur J Clin Pharmacol 2021;77:1465–71.33963877
2 Datta P, Bramnik A, Rewers-Felkins K, et al. Transfer of apixaban into human milk. Obstet Gynecol 2021;137:1080–2.33957661
3 Zhao Y, Arya R, Couchman L, et al. Are apixaban and rivaroxaban distributed into human breast milk to clinically relevant concentrations? Blood 2020;136:1783–5.32488251
4 Butler AS, Cole S, Arya R, et al. Considerations of safety for women prescribed apixaban or rivaroxaban who breastfeed? - a physiologically based pharmacokinetic analysis. J Thromb Haemost 2026;24:520–9.41161415
5 Yi B, Bae SH, Yang Y, et al. Mechanistic prediction of apixaban and rivaroxaban secretion into human milk and infant systemic exposure through an integrated physiologically based pharmacokinetic framework. Drug Metab Dispos 2026;54:100271.42008899

## Substance Identification

### Substance Name

Apixaban

### CAS Registry Number

503612-47-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins